# Tretinoin

CASRN: 302-79-4

## Drug Levels and Effects

### Summary of Use during Lactation

Tretinoin has not been studied during breastfeeding. Breastfeeding should be avoided during oral use and for 1 week after the last dose. Because it is poorly absorbed after topical application, it is considered a low risk to the nursing infant.[1] Do not apply tretinoin directly to the nipple and areola and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A review of adverse reaction reports on retinoids causing a breast reaction submitted to a French pharmacovigilance center found 1 case of gynecomastia was associated with topical tretinoin use.[2]

### Alternate Drugs to Consider

(Acne) Azelaic Acid, Benzoyl Peroxide, Clindamycin, Erythromycin; (Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680
2 Atzenhoffer M, Pierre S, Bellet F, et al. Gynecomastia and galactorrhea: Unlabeled adverse drug reactions of retinoids used in dermatology. Drug Safety 2018;41:1198-9. doi:10.1007/s40264-018-0719-2

## Substance Identification

### Substance Name

Tretinoin

### CAS Registry Number

302-79-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Dermatologic Agents

Keratolytic Agents

Retinoids